# Hepatitis B Immune Globulin (Human)

CASRN: 373609-41-7

## Drug Levels and Effects

### Summary of Use during Lactation

Hepatitis B immune globulin is an immune globulin (IgG) rich in IgG antibodies against hepatis B. IgG is a normal component of breastmilk that is likely to be partially destroyed in the infant's gastrointestinal tract and poorly absorbed by the infant. No special precautions are required during breastfeeding. Hepatitis B immune globulin is recommended along with hepatitis B vaccine to be given to infants of mothers who are positive for hepatitis B surface antigen. No differences exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives these preventative measures at birth.[1] Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[2,3]

### Drug Levels

Maternal Levels. Colostrum (3 days postpartum) and milk (7 days postpartum) samples from 2 mothers who were receiving intravenous immunoglobulin (IVIG) for the treatment of common variable immunodeficiency were studied. One mother was receiving 400 to 500 mg/kg of IVIG monthly and the other received 600 to 700 mg/kg of IVIG monthly. The time of the last dose before sample collection was not reported. Immune globulin G (IgG) concentrations were normal in the first mother's colostrum and milk and higher than normal in the colostrum of the second mother. IgM levels were normal in the colostrum and milk first mother and low in the second.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Xiao F, Lan A, Mo W. (2020). Breastfeeding from mothers carrying HBV would not increase the risk of HBV infection in infants after proper immunoprophylaxis. Minerva Pediatr.
2 Visvanathan K, Dusheiko G, Giles M, et al. (2016). Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut.
3 Dionne-Odom J, Tita AT, Silverman NS. (2016). #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol.
4 Palmeira P, Costa-Carvalho BT, Arslanian C, et al. (2009). Transfer of antibodies across the placenta and in breast milk from mothers on intravenous immunoglobulin. Pediatr Allergy Immunol.

## Substance Identification

### Substance Name

Hepatitis B Immune Globulin (Human)

### CAS Registry Number

373609-41-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Immunoglobulin G

Immunoglobulins